# Ropivacaine

CASRN: 84057-95-4

## Drug Levels and Effects

### Summary of Use during Lactation

Ropivacaine passes into milk poorly and is not orally absorbed by breastfed infants. Infants appear not to be affected by the small amounts of drug in breastmilk.

Local anesthetics administered during labor and delivery with other anesthetics and analgesics have been reported by some to interfere with breastfeeding. However, this assessment is controversial and complex because of the many different combinations of drugs, dosages and patient populations studied as well as the variety of techniques used. Published data on the use of ropivacaine and fentanyl used during labor and delivery in a small number of women found little or no adverse effect on breastfeeding in one study, but decreased milk production and reduced rate of breastfeeding in another.[1,2] Although not well studied specifically with ropivacaine, it appears that with good breastfeeding support, epidural local anesthetics with or without fentanyl or one of its derivatives has little or no adverse effect on breastfeeding success.[3] Labor pain medication may delay the onset of lactation.

### Drug Levels

Maternal Levels. Twenty-five women undergoing cesarean section received ropivacaine 0.15% and fentanyl 2 mcg/mL for patient-controlled epidural analgesia at a basal rate of 6 mL (9 mg of ropivacaine)/hour and a demand dose of 4 mL (6 mg ropivacaine)/20 minutes. The cumulative maternal dosages of ropivacaine at 18 and 24 hours averaged 188 mg (range 69 to 296 mg), and 248 mg (131 to 378 mg), respectively. At 18 and 24 hours postpartum, colostrum ropivacaine concentrations averaged 246 mcg/L and 301 mcg/L, respectively.[4] Using these results, a neonate who ingests about 40 mL of colostrum during the first 24 hours of life would receive only 10 to 12 mcg of ropivacaine.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Twenty-five infants whose mothers received a combination of ropivacaine and fentanyl for patient-controlled epidural analgesia for pain associated with cesarean section had normal Apgar and Neurological and Adaptive Capacity scores. No adverse effects were noted in any of the infants.[4]

A retrospective cohort study compared the breastfeeding success among multiparous women with a vaginal delivery who received postpartum epidural analgesia. One group received 0.15% ropivacaine for analgesia and the other group received 0.15% ropivacaine plus 10 mg of dexamethasone. The epidural was continued for 48 hours. There were no significant differences in 1-minute Apgar scores, 5-minute Apgar scores, neonatal jaundice, hypoglycemia, or infection rates nor on neonatal hospital stay duration or neonatal intensive care unit admission rates.[5]

### Effects on Lactation and Breastmilk

A prospective cohort study compared women who received no analgesia (n = 63) to women who received continuous epidural analgesia with fentanyl and either 0.08 or 0.2% ropivacaine (n = 13) or bupivacaine (n = 39) during labor and delivery. The total dosage of ropivacaine was 50 to 124 mg and the average total infusion time from start to delivery was 219 minutes. The study found no differences between the groups in breastfeeding effectiveness or infant neurobehavioral status at 8 to 12 hours postpartum or the number exclusively or partially breastfeeding at 4 weeks postpartum.[6]

A randomized, prospective study compared mothers who received epidural labor analgesia with ropivacaine (n = 75) to mothers who did not receive labor analgesia (n = 49). In the treatment group, 3 mL of ropivacaine 0.125% was injected epidurally, followed in some mothers by an additional 12 mL. In all treated mothers, 5 mL per hour was then given as a continuous epidural infusion. Although serum prolactin concentrations were somewhat lower in the group who received ropivacaine, no difference was seen between the groups in time of lactation onset, number of women with extensive lactation, and the decrease in infant weight reduction.[7]

A nonrandomized study at one Italian hospital compared primiparous mothers undergoing vaginal delivery who received epidural analgesia (n = 64) to those who did not (n = 64). Mothers who requested the epidural analgesia received an initial dose of 100 mcg of fentanyl diluted to 10 mL with saline. After the initial fentanyl, doses of 15 to 20 mL of 0.1% ropivacaine were administered, if needed; however, the number of women who received ropivacaine was not reported. The only difference between the groups of mothers was a longer duration of labor among the treated mothers. The quality of infant nursing was equal between the 2 groups of infants on several measures; however, more infants in the treated group breastfed for less than 30 minutes at the first feeding.[8]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[9]

A nonrandomized convenience sample of women who did (n = 209) or did not (n = 157) receive epidural analgesia during labor was analyzed to determine whether epidurals affected the onset of lactation. Although not standardized, the typical procedure used sufentanil 10 to 15 mg together with either ropivacaine 0.1% or levobupivacaine 0.0625% epidurally, supplemented by epidural boluses of ropivacaine 0.1% or levobupivacaine 0.0625% about every 2 hours. No difference was found in the time of lactation onset between the two groups. Although women in both groups stated they wished to breastfeed prior to delivery, exclusive breastfeeding at 20 days postpartum was less frequent in the women who received an epidural (43%) than in women who did not (57%).[10]

A retrospective study in a Spanish public hospital compared the infants of mothers who received an epidural during labor that contained fentanyl and either bupivacaine or ropivacaine. Infants of mothers who received an epidural had a lower frequency of early breastfeeding.[11]

A study in China compared an epidural infusion of ropivacaine 700 mcg/hour (n = 76) to sufentanil 1.75 mcg/hour plus ropivacaine 700 mcg/hour (n = 81) during normal vaginal delivery. The combined ropivacaine and sufentanil provided better pain control than ropivacaine alone. Onset of lactation was shorter and lactation adequacy (milk volume) was better in the combined group than in the ropivacaine-only group.[12]

In a study of primiparous women with an uncomplicated pregnancy, some women received epidural analgesia with ropivacaine (dose not specified) and fentanyl in a median dose of 121 mcg (IQR 77 to 192 mcg), some received oxytocin alone and other received neither. Breastfeeding outcomes in the three groups were compared at 3 days, 1 month and 4 months postpartum. The study found no relationship between low-dose oxytocin use and breastfeeding success, but that epidermal analgesia lowered milk supply at 3 days and 1 month postpartum, and decreased rates of breastfeeding at 4 months postpartum.[2]

A retrospective cohort study compared the breastfeeding success among multiparous women with a vaginal delivery who received postpartum epidural analgesia. One group received 0.15% ropivacaine for analgesia and the other group received 0.15% ropivacaine plus 10 mg of dexamethasone. The epidural was continued for 48 hours. At 24 hours postpartum, the dexamethasone group had lower blood levels of TNF-α, IL-6, and C-reactive protein, and higher levels of IL-10. The time to first breastfeeding was shorter in the dexamethasone group (38 vs. 52 minutes). The dexamethasone group also had a higher breastfeeding rate within 48 hours postpartum and a higher exclusive breastfeeding rate on day 7 postpartum. No differences in maternal adverse effects were seen.[5]

### Alternate Drugs to Consider

Bupivacaine, Lidocaine

### References

1 French CA, Cong X, Chung KS. Labor epidural analgesia and breastfeeding: A systematic review. J Hum Lact 2016;32:507–20.27121239
2 Takahata K, Horiuchi S, Miyauchi A, et al. A longitudinal study of the association of epidural anesthesia and low-dose synthetic oxytocin regimens with breast milk supply and breastfeeding rates. Sci Rep 2023;13:21146.38036700
3 Heesen P, Halpern SH, Beilin Y, et al. Labor neuraxial analgesia and breastfeeding: An updated systematic review. J Clin Anesth 2021;68:110105.33069970
4 Matsota PK, Markantonis SL, Fousteri MZ, et al. Excretion of ropivacaine in breast milk during patient-controlled epidural analgesia after cesarean delivery. Reg Anesth Pain Med 2009;34:126–9.19282712
5 Ye H, Wang X, Zhou D, et al. Effect of ropivacaine-dexamethasone combination on postpartum uterine pain, inflammation, and breastfeeding in multiparous women. Am J Transl Res 2026;18:2862–81.42170484
6 Chang ZM, Heaman MI. Epidural analgesia during labor and delivery: Effects on the initiation and continuation of effective breastfeeding. J Hum Lact 2005;21:305–14.16113019
7 Chen YM, Li Z, Wang AJ, et al. Effect of labor analgesia with ropivacaine on the lactation of paturients. Zhonghua Fu Chan Ke Za Zhi 2008;43:502–5.19080512
8 Gizzo S, Di Gangi S, Saccardi C, et al. Epidural analgesia during labor: Impact on delivery outcome, neonatal well-being, and early breastfeeding. Breastfeed Med 2012;7:262–8.22166068
9 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167–73.24451212
10 Mauri PA, Contini NN, Giliberti S, et al. Intrapartum epidural analgesia and onset of lactation: A prospective study in an Italian birth centre. Matern Child Health J 2015;19:511–8.24894732
11 Herrera-Gómez A, García-Martínez O, Ramos-Torrecillas J, et al. Retrospective study of the association between epidural analgesia during labour and complications for the newborn. Midwifery 2015;31:613–6.25819707
12 Wen X, Huang B, Liang X. Effect of ropivacaine and sufentanil in epidural labor analgesia. Am J Transl Res 2021;13:7001–7.34306455

## Substance Identification

### Substance Name

Ropivacaine

### CAS Registry Number

84057-95-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local